# Chlorothiazide

CASRN: 58-94-6

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of chlorothiazide in milk are low, but high doses might suppress lactation. Low-dose chlorothiazide appears to be acceptable during lactation. Intense diuresis with large doses may decrease breastmilk production.

### Drug Levels

Maternal Levels. After a single dose of 500 mg of chlorothiazide orally, there was no detectable drug (<1 mg/L) in the breastmilk from 11 nursing mothers at 1, 2 and 3 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on chlorothiazide was not found as of the revision date. Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[2-4] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Hydrochlorothiazide

### References

1 Werthmann MW, Jr, Krees SV. Excretion of chlorothiazide in human breast milk. J Pediatr 1972;81:781–3.5074355
2 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277:1353–4. doi:10.1016/S0140-6736(61)90289-6
3 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
4 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188–90.13973786

## Substance Identification

### Substance Name

Chlorothiazide

### CAS Registry Number

58-94-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics